# Carbamide Peroxide

CASRN: 124-43-6

## Drug Levels and Effects

### Summary of Use during Lactation

Carbamide (urea) peroxide has not been studied during breastfeeding. It is unlikely that carbamide peroxide found in ear drops or teeth whiteners is absorbed into the bloodstream. However, if any carbamide peroxide were absorbed, it would be broken down to urea and hydrogen peroxide, both of which are found normally in human milk.[1,2] If carbamide peroxide is used by the mother according to directions, it is not a reason to discontinue breastfeeding and no special precautions are required.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Clark RM, Ross SA, Hill DW, et al. (1987). Within-day variation of taurine and other nitrogen substances in human milk. J Dairy Sci.
2 Al-Kerwi EA, Al-Hashimi AH, Salman AM. (2005). Mother's milk and hydrogen peroxide. Asia Pac J Clin Nutr.

## Substance Identification

### Substance Name

Carbamide Peroxide

### CAS Registry Number

124-43-6

### Drug Class

Breast Feeding

Lactation

Peroxides